# Human Papillomavirus Vaccines

## Drug Levels and Effects

### Summary of Use during Lactation

In general, vaccines given to a nursing mother do not affect the safety of breastfeeding for mothers or infants.[1-4] A slightly higher percentage of infants who were breastfed during or after maternal vaccination with the active quadrivalent human papillomavirus vaccine (Gardasil) had pneumonia during the 30 days after maternal vaccination, but these effects were not thought to be vaccine related. No similar data exist for the bivalent vaccine (Cervarix). Maternal vaccination with human papillomavirus vaccine is not a contraindication to breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A total of 995 nursing mothers were given Gardasil or placebo during the vaccination period of the clinical trials (vaccine n = 500, control n = 495). A total of 17 (3.4%) and nine (1.8%) infants of women who breastfed who received quadrivalent HPV vaccine or placebo, respectively, experienced a serious adverse event. Of the 23 experiences among the 17 infants of women who received vaccine, 12 were respiratory infections, five were gastroenteritis or diarrhea, and the remaining included various other single events. None of the reactions were considered to be vaccine related.[5,6]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Gruslin A, Steben M, Halperin S, et al. Immunization in pregnancy: No. 220, December 2008. Int J Gynaecol Obstet 2009;105:187–91.19367691
2 Harpaz R, Ortega-Sanchez IR, Seward JF. Prevention of Herpes zoster: Recommendations of the advisory committee on immunization practices (ACIP). MMWR Recomm Rep 2008;57 (RR-5):1–30.18528318
3 Committee opinion no. 467: Human papillomavirus vaccination. Obstet Gynecol 2010;116:800–3.20733476
4 Kroger A, Bahta L, Long S, et al. CDC. General Best Practices for Immunization. 2024. https://www.cdc.gov/vaccines/hcp/acip-recs/general-recs/index.html
5 Markowitz LE, Dunne EF, Saraiya M, et al. Quadrivalent human papillomavirus vaccine: recommendations of the Advisory Committee on Immunization Practices (ACIP). MMWR Recomm Rep 2007;56 (RR-2):1–24.17380109
6 Garland SM, Ault KA, Gall SA, et al. Pregnancy and infant outcomes in the clinical trials of a human papillomavirus type 6/11/16/18 vaccine: A combined analysis of five randomized controlled trials. Obstet Gynecol 2009;114:1179–88.19935017

## Substance Identification

### Substance Name

Human Papillomavirus Vaccines

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines